# Piritramide

CASRN: 302-41-0

## Drug Levels and Effects

### Summary of Use during Lactation

Piritramide is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Limited data indicate that the amounts of piritamide in colostrum is very low after use of intravenous piritamide by patient-controlled analgesia.

Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If piritramide is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of piritramide to 2 to 3 days at a low dosage with close infant monitoring. If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

Maternal Levels. Ten women who had received piritamide intravenously by patient-controlled analgesia during the first 48 hours following a cesarean section had drug concentrations measured in their colostrum. The timing of samples was not reported. Six of the women had concentration of piritamide below the lower limit of quantification (<30 mcg/L). Of the other 4 women, the highest concentration was 75 mcg/L.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Van Eeckhaut A, Vanfleteren P, Van Schoors J, et al. Quantification of piritramide in human colostrum. J Clin Pharm Ther 2017;42:306-10.28295465

## Substance Identification

### Substance Name

Piritramide

### CAS Registry Number

302-41-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics